# Semaglutide

CASRN: 910463-68-2

## Drug Levels and Effects

### Summary of Use during Lactation

Semaglutide was not detectable in the milk of mothers taking the drug subcutaneously. Their breastfed infants experienced no adverse effects. Some brands of oral semaglutide, such as Rybelsus, contain the absorption enhancer salcaprozate sodium, which may enter milk and accumulate in infants. Only injectable forms of semaglutide should be used during breastfeeding. Some experts recommend closely monitoring of infant growth and developmental milestones and the nutritional status of the lactating woman.[1]

### Drug Levels

Maternal Levels. Eight nursing mothers, who were using subcutaneous semaglutide in doses ranging from 0.25 to 1 mg weekly, donated milk samples at 0,12 and 24 hours after a dose. None of the samples contained any measurable semaglutide (<1.7 mcg/L). The authors calculated that if milk had contained semaglutide at the detection limit, the relative infant dose would have averaged only 1.12%.[2] This does not take into consideration that the drug is poorly absorbed orally, with a maximum bioavailability of 1% in adults.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Eight nursing mothers were using subcutaneous semaglutide in doses ranging from 0.25 to 1 mg weekly. Their infants ranged in age from 4 to 23 months of age and were mixed fed. They were fed breastmilk for 3 to 9 weeks while their mothers were taking semaglutide. All of the infants were reported to have normal growth and development by their mothers.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Diabetes) Acarbose, Colesevelam, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Tirzepatide; (Weight Loss) Tirzepatide

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.42528099
2 Diab H, Fuquay T, Datta P, . Subcutaneous semaglutide during breastfeeding: Infant safety regarding drug transfer into human milk. Nutrients 2024;16:2886.39275201

## Substance Identification

### Substance Name

Semaglutide

### CAS Registry Number

910463-68-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists